# Plecanatide

CASRN: 467426-54-6

## Drug Levels and Effects

### Summary of Use during Lactation

Plecanatide is not absorbed from the gastrointestinal tract and the drug and its active metabolite are not measurable in milk following administration of recommended doses to nursing mothers. Plecanatide is not expected to cause any adverse effects in breastfed infants. No special precautions are required.

### Drug Levels

Maternal Levels. Plecanatide 3 mg was administered orally once daily for 2 weeks to 7 mothers who had been nursing for at least 4 weeks. Plecanatide and its active metabolite were not measurable (detection limit not specified) in breastmilk samples collected before a dose or at 2, 6, or 12 hours after a dose.[1,2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Irritable Bowel Syndrome) Linaclotide, Lubiprostone, Prucalopride, Psyllium, Tenapanor

### References

1 Bausch Health Americas Inc. A postmarketing study of plecanatide in breast milk of lactating women treated with Trulance. Clinical Trials.gov 2018:NCT03551873. https://clinicaltrials.gov/ct2/show/NCT03551873?term=NCT03551873&draw=2&rank=1
2 Salix Pharmaceuticals Inc. Trulance Package Insert. 2020

## Substance Identification

### Substance Name

Plecanatide

### CAS Registry Number

467426-54-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Gastrointestinal Agents

Peptides

Guanylyl Cyclase C Agonists

Laxatives